# Hepatitis B Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

The Centers for Disease Control and Prevention and several health professional organizations state that vaccines given to a nursing mother do not affect the safety of breastfeeding infants and that breastfeeding is not a contraindication to the hepatitis B vaccine. Hepatitis B vaccine is recommended along with hepatitis B immune globulin to be given by injection to infants of mothers who are positive for hepatitis B surface antigen. No differences exist in infection rates between breastfed and formula-fed infants born to hepatitis B-infected women, as long as the infant receives these preventative measures at birth.[1] Breastfeeding improves the infant’s response to hepatitis B immunization.[2] Mothers with hepatitis B are encouraged to breastfeed their infants after their infants receive these preventative measures.[3,4] Breastfeeding also appears to reduce infant side effects associated with routine childhood immunization. Breastfed infants should be vaccinated according to the routine recommended schedules.[5]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Breastfeeding can enhance the response of the infant to certain vaccine antigens.[2,5-7] Breastfed infants are also less likely to have fever and may be less likely to experience anorexia and reduced energy intake after routine childhood immunization than those who are not breastfed.[8,9]

Breastfed infants of hepatitis B surface antigen positive mothers have a different response in the development of immunoglobulin subtypes after vaccination with hepatitis B vaccine than do formula-fed infants.[10] However, breastfeeding does not interfere with the infant's antibody response to hepatitis B vaccine.[11]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Xiao F, Lan A, Mo W. Breastfeeding from mothers carrying HBV would not increase the risk of HBV infection in infants after proper immunoprophylaxis. Minerva Pediatr 2020;72:109–15.28353321
2 Liu H, Li L, Li Y, et al. Vaginal delivery and breastfeeding benefit infant immune response to hepatitis B vaccine: A prospective cohort study. J Clin Transl Hepatol 2023;11:899–907.37408801
3 Visvanathan K, Dusheiko G, Giles M, et al. Managing HBV in pregnancy. Prevention, prophylaxis, treatment and follow-up: Position paper produced by Australian, UK and New Zealand key opinion leaders. Gut 2016;65:340–50.26475631
4 Dionne-Odom J, Tita AT, Silverman NS. #38: Hepatitis B in pregnancy screening, treatment, and prevention of vertical transmission. Am J Obstet Gynecol 2016;214:6–14.26454123
5 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
6 Silfverdal SA, Bodin L, Ulanova M, et al. Expression of idiotypic antibodies-1 and -2 and breastfeeding in relation to antibody levels against Haemophilus influenzae type b in children. Scand J Immunol 2006;63:371–5.16640661
7 Pabst HF. Immunomodulation by breast-feeding. Pediatr Infect Dis J 1997;16:991–5.9380478
8 Pisacane A, Continisio P, Palma O, et al. Breastfeeding and risk for fever after immunization. Pediatrics 2010;125:e1448–52.20478932
9 López-Alarcón M, Garza C, Habicht JP, et al. Breastfeeding attenuates reductions in energy intake induced by a mild immunologic stimulus represented by DPTH immunization: possible roles of interleukin-1beta, tumor necrosis factor-alpha and leptin. J Nutr 2002;132:1293–8.12042449
10 Azzari C, Resti M, Rossi ME, et al. Modulation by human milk of IgG subclass response to hepatitis B vaccine in infants. J Pediatr Gastroenterol Nutr 1990;10:310–5.2324890
11 Wang JS, Zhu QR, Wang XH. Breastfeeding does not pose any additional risk of immunoprophylaxis failure on infants of HBV carrier mothers. Int J Clin Pract 2003;57:100–2.12661791

## Substance Identification

### Substance Name

Hepatitis B Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines